# Agomelatine

CASRN: 138112-76-2

## Drug Levels and Effects

### Summary of Use during Lactation

Agomelatine is not approved for marketing in the United States by the U.S. Food and Drug Administration (FDA), but is available in other countries. Some follow-up data reported possible drowsiness and developmental concerns in one infant, but no problems in 16 other breastfed infants. A minimal amount of information indicates that exposure and adverse effects can be avoided in breastfed infants if breastfeeding is held for 4 hours after a dose.

### Drug Levels

Maternal Levels. A woman who was taking quetiapine 200 mg daily for postpartum psychosis had agomelatine 25 mg daily added after 1 week of therapy because of depressive symptoms. A mixture of fore- and hindmilk samples were collected 10 min before and 30, 60, 90, 120, and 240 minutes after each dose for the first 3 days of agomelatine therapy. Peak agomelatine milk levels of 0.78 to 2 mcg/L occurred at 60 to 120 minutes after the dose. On all 3 days, the milk concentration was undetectable (<0.1 mcg/L) at 240 minutes after the dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman with severe postpartum depression was given agomelatine 25 mg daily at bedtime. She breastfed her infant for 12 weeks, taking the dose after her last breastfeeding of the day and then pumping her milk in the morning before resuming breastfeeding. Her use of formula, if any, was not mentioned. She breastfed normally during the day. Her infant developed normally and had no abnormal laboratory values or adverse effects during the 12-week period.[2]

A prospective study followed 14 mothers taking agomelatine from birth and their 16 breastfed infants. The women were taking an average dose of 25 mg daily, with a range of 25 mg twice weekly to 50 mg daily. Infants were breastfed for an average of 7.4 months. Thirteen mothers did not report any short- or long-term adverse effects. One mother reported a possible adverse reaction of drowsiness in her baby in the first few weeks after birth which she attributed to agomelatine. She was taking agomelatine in an unspecified dose with duloxetine 90 mg daily and continued breastfeeding her baby until 9 months of age. She reported some developmental concerns of speech and low muscle tone in her baby who was 9 months of age at the time of follow-up.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Schmidt FM, Lichtblau N, Uribe MM, et al. Agomelatine in breast milk. Int J Neuropsychopharmacol 2013;16:497-9.22781637
2 Xiao L. Agomelatine for postpartum depression and breastfeeding. Ther Adv Psychopharmacol 2021;11.
3 Kwok S, Cupitt D, Kennedy D. Breastfeeding exposure to agomelatine – Preliminary findings from an Australian observational cohort study. Neurotoxicol Teratol 2023;98:16-7. doi:10.1016/j.ntt.2023.107222

## Substance Identification

### Substance Name

Agomelatine

### CAS Registry Number

138112-76-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressants